# Cladribine

CASRN: 4291-63-8

## Drug Levels and Effects

### Summary of Use during Lactation

The amount of cladribine in milk is low with oral doses of 10 to 20 mg daily used in multiple sclerosis. Data in one patient indicates that the drug is rapidly eliminated over 24 hours and undetectable at 48 hours after a dose. Manufacturers recommend a 7-day (Europe) or 10-day (US) breastfeeding abstinence period after a dose. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[1] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[2]

### Drug Levels

Maternal Levels. A woman with multiple sclerosis who was 4 months postpartum began cladribine. In her second course of therapy, 5 weeks after the first course, she received 20 mg cladribine once daily by mouth on days 1 to 3 and 10 mg on days 4 and 5. On day 3, the patient collected samples at 0, 1, 2, 4, 6, 8, 12, and 24 hours after a 20 mg dose. The highest milk level was 281 mcg/L at 1 hour after the dose. Levels declined rapidly over 12 to 24 hours, to undetectable (<1.5 mcg/L) levels at 48 hours and beyond. The average milk level was 44 mcg/L over the 24 hour period. The authors calculated that a fully breastfed infant would receive a dose of 6.6 mcg/kg daily, which corresponds to a weight-adjusted dose of 3.1% of the maternal dose.[3] A further analysis of two patients taking cladribine for multiple sclerosis found relative infant dosages of 2.99% with a 10 mg daily dosage and 4.73% with a 20 mg daily dosage. Peak milk concentrations were seen at 1 and 2 hours after the dose, respectively.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon beta, Methylprednisolone, Natalizumab, Ocrelizumab, Ofatumumab, Peginterferon beta

### References

1 Urbaniak C, McMillan A, Angelini M, . Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
2 Stopenski S, Aslam A, Zhang X, Cardonick E. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91–7.28170295
3 Datta P, Ciplea AI, Rewers-Felkins K, . Cladribine transfer into human milk: A case report. Mult Scler 2021;27:799–801.32507055
4 Datta P, Hale TW, Thiel S, . Low transfer of cladribine into human milk. Mult Scler 2023;29:1346–7.37392023

## Substance Identification

### Substance Name

Cladribine

### CAS Registry Number

4291-63-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Immunosuppressive Agents